# BCG Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

In general, vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to the BCG vaccine. Breastfed infants should be vaccinated according to the routine recommended schedules.[1,2] An exception is to avoid BCG vaccine in the first 6 months in infants whose mothers received an anti-TNF immunosuppressant during pregnancy.[3,4] Bladder installation of BCG vaccine is acceptable, but pre-treatment BCG vaccination of the infant may be advisable.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In one study, breastfeeding improved the cellular immune response to BCG vaccine if the vaccine was given at birth. However, if the vaccine was given at 1 month of age, breastfeeding had no effect.[5]

A nursing mother presented with bladder carcinoma 2 months postpartum. After deciding to treat her with intravesicular BCG vaccine, her infant was given the BCG vaccine subcutaneously 2 weeks before the mother’s first treatment. The mother continued to breastfeed her infant throughout 6 courses of induction therapy and the initial 3 weekly maintenance treatments. The infant had no reported adverse effects, such as systemic dissemination of BCG.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gruslin A, Steben M, Halperin S, et al. Immunization in pregnancy: No. 220, December 2008. Int J Gynaecol Obstet 2009;105:187–91.19367691
2 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
3 Gisbert JP, Chaparro M. Vaccines in children exposed to biological agents in utero and/or during breastfeeding: Are they effective and safe? J Crohns Colitis 2023;17:995–1009.36652274
4 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910–26.40287311
5 Pabst HF, Godel J, Grace M, et al. Effect of breast-feeding on immune response to BCG vaccine. Lancet 1989;1:295–7.2563456
6 Barbur E, Doganca T, Obek C. Safe use of intravesical bacillus Calmette-Guérin immunotherapy for bladder cancer during breastfeeding: A case report. Immunotherapy 2022;14:759–64.35754395

## Substance Identification

### Substance Name

BCG Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines